# Trofinetide

CASRN: 853400-76-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of trofinetide during breastfeeding. If trofinetide is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, trofinetide should be used with careful infant monitoring for diarrhea and proper weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Trofinetide

### CAS Registry Number

853400-76-7

### Drug Class

Breast Feeding

Lactation

Milk, Human